# Dicyclomine

CASRN: 77-19-0

## Drug Levels and Effects

### Summary of Use during Lactation

Dicyclomine has not been well studied during breastfeeding. However, one possible case of apnea has been reported in a breastfed infant that is similar to reactions that have occurred in infants given the drug directly.[1] Dicyclomine should not be used during lactation.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date. However, the manufacturer reported a mother who was given a single 20 mg dose of dicyclomine orally. Two hours after the dose, the concentration in breastmilk was 131 mcg/L.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date. The manufacturer reported a breastfed infant who developed apnea during maternal therapy with dicyclomine.[1] Dicyclomine is a possible cause of the reaction.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. Anticholinergics can inhibit lactation in animals, apparently by inhibiting growth hormone and oxytocin secretion.[2–6] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[7] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Briggs GG, Freeman RK, Towers CV, Forinash AB. Drugs in pregnancy and lactation, 11th ed. Philadelphia. Wolters Kluwer. 2017.
2 Aaron DK, Ely DG, Deweese WP, . Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci 1997;75:1434–42.9250502
3 Powell MR, Keisler DH. A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci 1995;73:1901–5.7592071
4 Daniel JA, Thomas MG, Powell MR, Keisler DH. Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci 1997;75:1359–62.9159285
5 Bizzarro A, Iannucci F, Tolino A, . Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol 1980;7:108–11.6788407
6 Svennersten K, Nelson L, Juvnäs-Moberg K. Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand 1992;145:193–4.1636447
7 Masala A, Alagna S, Devilla L, . Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest 1982;5:53–5.6808052

## Substance Identification

### Substance Name

Dicyclomine

### CAS Registry Number

77-19-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Muscarinic Antagonists

Parasympatholytics